# Trichloroacetic Acid

CASRN: 76-03-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of trichloroacetic acid on the skin during breastfeeding. Because it is unlikely to be appreciably absorbed or appear in breastmilk, it is considered safe to use during breastfeeding.[1] Avoid application to areas of the body that might come in direct contact with the infant's skin or where the drug might be ingested by the infant via licking.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lee KC, Korgavkar K, Dufresne RG, et al. (2013). Safety of cosmetic dermatologic procedures during pregnancy. Dermatol Surg.

## Substance Identification

### Substance Name

Trichloroacetic Acid

### CAS Registry Number

76-03-9

### Drug Class

Breast Feeding

Lactation

Dermatologic Agents

Keratolytic Agents